# Garcinia

CASRN: 9000-25-3

## Drug Levels and Effects

### Summary of Use during Lactation

Garcinia (Garcinia cambogia) fruit rind contains hydroxycitric acid. Garcinia has no specific lactation-related uses. It is most often used to promote weight loss. No data exist on the excretion of any components of Garcinia into breastmilk or on the safety and efficacy of Garcinia in nursing mothers or infants. Garcinia and hydroxycitric acid are generally well tolerated in adults, with occasional gastrointestinal discomfort reported.[1] Because there is no published experience with Garcinia or hydroxycitric acid during breastfeeding, these products should probably be avoided, especially while nursing a newborn or preterm infant.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements (https://toxnet.nlm.nih.gov/help/LactMedDietarySupps.htm) is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Soni M, Burdock G, Preuss H, et al. Safety assessment of (-)-hydroxycitric acid and Super CitriMax, a novel calcium/potassium salt. Food Chem Toxicol 2004;42:1513-29.15234082

## Substance Identification

### Substance Name

Garcinia

### Scientific Name

Garcinia cambogia

### CAS Registry Number

9000-25-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Phytotherapy

Plants, Medicinal